# Pertuzumab

CASRN: 380610-27-5

## Drug Levels and Effects

### Summary of Use during Lactation

Pertuzumab milk concentrations were collected in one mother. Concentrations were low, consistent with it being a large protein molecule with a molecular weight of about 148,000 Da.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, pertuzumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during pertuzumab therapy and for 7 months after the last dose.

### Drug Levels

Maternal Levels. A woman was diagnosed with breast cancer in pregnancy and received five cycles of 75 mg docetaxel during pregnancy. As soon as clinically feasible postpartum, she was given pertuzumab 1200 mg intravenously in the first cycle. Fifteen milk samples were collected over 17 days after the first dose except for days 6, 8, and 14 because no milk was produced on those days. Milk pertuzumab concentrations ranged between 137 and 3034 mcg/L, with the highest concentration found 17 days after the dose.[3] The authors calculated relative infant dosage in a nonstandard way that did not take low oral bioavailability into account, thereby overstating infant exposure, so it is not reported here.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Buitelaar PLM, Pluim D, Hanssens S, et al. Transfer of trastuzumab and pertuzumab into human breast milk: A case report. Cancer Chemother Pharmacol 2026;96:53.42159752

## Substance Identification

### Substance Name

Pertuzumab

### CAS Registry Number

380610-27-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents